# Pneumococcal Vaccines

## Drug Levels and Effects

### Summary of Use during Lactation

The Centers for Disease Control and Prevention and other expert opinion state that vaccines given to a nursing mother do not affect the safety of breastfeeding for mothers or infants and that breastfeeding is not a contraindication to pneumococcal vaccine.[1-3] Immunization of the mother during the third trimester of pregnancy markedly increases the amount of pneumococcal antibodies in breastmilk.[4] Breastfed infants should be vaccinated according to the routine recommended schedules.[1]

### Drug Levels

Maternal Levels. A study followed mothers who received the 23-valent pneumococcal polysaccharide vaccine. Mothers who received the vaccination during pregnancy or within 72 hours postpartum had sIgA and IgG in their breastmilk that persisted for at least 7 months postpartum.[5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Limited data indicate that breastfeeding can enhance the response of the infant to certain vaccine antigens.[1,6] Infants breastfed for longer than 90 days have a better antibody response to some pneumococcal strains in the vaccine at 13 months of age than those breastfed less than 90 days.[7] Some evidence of decreased pneumococcal disease has been found among breastfed infants of vaccinated mothers.[8]

### Effects on Lactation and Breastmilk

Immunization of pregnant women with pneumococcal vaccine increased the specific secretory IgA content of milk and colostrum.[8-13] These antibodies in colostrum help inhibit epithelial adhesion of pneumococci to pharyngeal epithelial cells.[9]

### References

1 Kroger A, Bahta L, Long S, . CDC. General Best Practices for Immunization. 2024. https://www.cdc.gov/vaccines/hcp/acip-recs/general-recs/index.html
2 Jamieson DJ, Munoz FM, Rasmussen SA. Maternal immunization. Obstet Gynecol 2026;147:661-78.41712936
3 Levin L, Valencia S, Ault K. Ensuring maternal and infant protection: A commentary on pneumococcal vaccine safety in pregnancy and lactation. J Womens Health (Larchmt) 2026:15409996261474639.
4 Maertens K, De Schutter S, Braeckman T, . Breastfeeding after maternal immunisation during pregnancy: Providing immunological protection to the newborn: A review. Vaccine 2014;32:1786-92.24530929
5 Martinovich KM, Seppanen EJ, Bleakley AS, . Evidence of maternal transfer of antigen-specific antibodies in serum and breast milk to infants at high-risk of S. pneumoniae and H. influenzae disease. Front Immunol 2022;13:1005344.36211411
6 Pabst HF. Immunomodulation by breast-feeding. Pediatr Infect Dis J 1997;16:991-5.9380478
7 Silfverdal SA, Ekholm L, Bodin L. Breastfeeding enhances the antibody response to Hib and pneumococcal serotype 6B and 14 after vaccination with conjugate vaccines. Vaccine 2007;25:1497-502.17097198
8 Lehmann D, Pomat WS, Riley ID, . Studies of maternal immunisation with pneumococcal polysaccharide vaccine in Papua New Guinea. Vaccine 2003;21:3446-50.12850357
9 Deubzer HE, Obaro SK, Newman VO, . Colostrum obtained from women vaccinated with pneumococcal vaccine during pregnancy inhibits epithelial adhesion of Streptococcus pneumoniae. J Infect Dis 2004;190:1758-61.15499530
10 Finn A, Zhang Q, Seymour L, . Induction of functional secretory IgA responses in breast milk, by pneumococcal capsular polysaccharides. J Infect Dis 2002;186:1422-9.12404157
11 Muñoz FM, Englund JA, Cheesman CC, . Maternal immunization with pneumococcal polysaccharide vaccine in the third trimester of gestation. Vaccine 2001;20:826-37.11738746
12 Obaro SK, Deubzer HE, Newman VO, . Serotype-specific pneumococcal antibodies in breast milk of Gambian women immunized with a pneumococcal polysaccharide vaccine during pregnancy. Pediatr Infect Dis J 2004;23:1023-9.15545857
13 Shahid NS, Steinhoff MC, Hoque SS, . Serum, breast milk, and infant antibody after maternal immunisation with pneumococcal vaccine. Lancet 1995;346:1252-7.7475716

## Substance Identification

### Substance Name

Pneumococcal Vaccines

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines